# Gossypium

## Drug Levels and Effects

### Summary of Use during Lactation

Gossypium herbaceum seeds contain pectin and the root bark and seeds contain gossypol. Gossypium is a purported galactogogue, and it may increase the complement C3 and C4 content of breastmilk. However, clinical trials supporting these uses are small and inadequate to validate its efficacy. Gossypol has caused hypokalemia, mild leukopenia and thrombocytopenia, fatigue, dry mouth, dry skin, and gastrointestinal upset. Galactogogues should never replace evaluation and counseling on modifiable factors that affect milk production.[1,2]

Dietary supplements do not require extensive pre-marketing approval from the U.S. Food and Drug Administration. Manufacturers are responsible to ensure the safety, but do not need to prove the safety and effectiveness of dietary supplements before they are marketed. Dietary supplements may contain multiple ingredients, and differences are often found between labeled and actual ingredients or their amounts. A manufacturer may contract with an independent organization to verify the quality of a product or its ingredients, but that does not certify the safety or effectiveness of a product. Because of the above issues, clinical testing results on one product may not be applicable to other products. More detailed information about dietary supplements is available elsewhere on the LactMed Web site.

### Drug Levels

Maternal Levels. An extract of Gossypium herbaceum seeds was given in a single oral dose of 20 grams containing 520 mg of pectin to 4 women who were 48 hours postpartum. Colostrum samples were obtained 120 minutes after administration. Complement C3 and C4 components of colostrum increased to a greater extent in treated women than in women who received a placebo. No increase in serum complement C3 and C4 occurred in either group. The authors proposed that pectin from Gossypium seeds stimulated secretion of complement C3 and C4 into colostrum and that this effect might increase the antibacterial activity of breastmilk.[3]

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Animal studies have demonstrated an increase in serum prolactin after intravenous administration of an extract of Gossypium herbaceum.[4] Some authors state that their unpublished data showed that oral administration of Gossypium seed extract to women increased their serum prolactin levels.[3]

A randomized study was done in India that compared the seed kernel of Gossypium herbaceum 10 grams per day in 3 divided doses to placebo for one month in healthy mothers to treat perceived insufficient milk supply. Entry into the study was based on maternal reports of insufficient milk supply and only mothers were blinded to the treatment. No maternal counseling on breastfeeding was provided. The principal finding of the study was that the volume of supplementary feedings decreased significantly from an average of 292 mL daily to 40 mL daily in the treatment group and decreased a statistically insignificant amount in the placebo group. No differences in infant weight gains were noted before and after treatment between the two groups. Twenty-one of the 30 mothers receiving the active drug were able to completely breastfeed their infants by the end of the study. Mothers who received the active product subjectively felt that they had a better milk supply and were more satisfied with nursing at the end of the study.[5]

### References

1 Brodribb W. ABM Clinical Protocol #9. (2018). Use of galactogogues in initiating or augmenting maternal milk production, second revision 2018. Breastfeed Med.
2 (2021). Breastfeeding challenges: ACOG Committee Opinion, Number 820. Obstet Gynecol.
3 Sepehri H, Roghani M, Houdebine ML. (1998). Oral administration of pectin-rich plant extract enhances C3 and C4 complement concentration in woman colostrum. Reprod Nutr Dev.
4 Sawadogo L, Thibault JF, Rouau X, et al. The lactogenic action of plant extracts. In, Martinet J, Houdebine LM, Herbert H, eds. Biology of lactation Paris Institut National de la Research Agrono 1999:553-64.
5 Manjula S, Sultana A, Rahman K. (2014). Clinical efficacy of Gossypium herbaceum L. seeds in perceived insufficient milk (PIM) supply: A randomized single-blind placebo-controlled study. Orient Pharm Exp Med.

## Substance Identification

### Substance Name

Gossypium

### Drug Class

Breast Feeding

Lactation

Complementary Therapies

Phytotherapy

Plants, Medicinal